# Iodofiltic Acid I 123

CASRN: 123748-56-1

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of iodofiltic acid I 123 (beta-methyl-15-(4-iodophenyl) pentadecanoic acid; I 123 BMIPP) as a diagnostic agent. The International Commission on Radiological Protection states that breastfeeding should be interrupted for more than 3 weeks following diagnostic use of I 123 BMIPP because of possible contamination with other iodine isotopes.[1] Because this contamination does not occur with modern production methods, discontinuation of nursing is not necessary, especially if a thyroid blocking agent is given to the mother.[2,3]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[4]

### Drug Levels

I 123 is a gamma emitter with a principal photon energy of 159 keV and a physical half-life of 13.1 hours.[2] Iodide is actively secreted into breastmilk and actively taken up by the mother's and infant's thyroid glands.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44 (2 Suppl):319-21.
2 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
3 Mattsson S, Leide-Svegborn S, Andersson M. X-ray and molecular imaging during pregnancy and breastfeeding-when should we be worried? Radiat Prot Dosimetry 2021;195:339-48.33855370
4 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203

## Substance Identification

### Substance Name

Iodofiltic Acid I 123

### CAS Registry Number

123748-56-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Iodine Radioisotopes

Diagnostic Agents